# Oxybate Salts

CASRN: 591-81-1

## Drug Levels and Effects

### Summary of Use during Lactation

Sodium, calcium, magnesium and potassium oxybate are salts of gamma-hydroxybutyric acid (GHB). GHB is an endogenous substance, and low amounts are normally found in breastmilk. Infants have been successfully breastfed by mothers taking sodium oxybate therapeutically for narcolepsy. With the typical 2 doses per night treatment regimen, nursing should usually be withheld from the time of the first dose to 4 to 6 hours after the second dose and breastfeeding can be continued during the day.[1] Large doses of GHB have been used as a substance of abuse. No information is available on the use or safety of GHB as a drug of abuse during breastfeeding. Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Blood and breastmilk samples were collected from 20 nursing mothers twice between the second week and fourth month postpartum. Endogenous breastmilk levels averaged 0.35 and 0.36 mg/L at the two time points. The authors proposed establishment of a normal GHB breastmilk reference range of 0.13 to 1.03 mg/L.[2]

A woman with narcolepsy with cataplexy took a single dose of sodium oxybate 4.5 grams. Breastmilk samples were obtained separately from the right and left breasts at 7 and 9 weeks postpartum. Milk concentrations from the right breast at week 9 postpartum had a peak value of 23.2 mg/L at 1 hour after the dose, decreasing to 3.1 mg/L at 4 hours after the dose and 1 mg/L at 5 hours after the dose, at which time the concentration was within the proposed endogenous breastmilk reference range of 0.13 to 1.03 mg/L. No differences were found between left and right breast or between week 7 and 9 samples.[2]

A paper reported two mothers with narcolepsy and cataplexy who collected breastmilk samples during therapeutic use of sodium oxybate. Neither breastfed her infant during this time. One mother who was 5 months postpartum took 3 grams of sodium oxybate twice a night for one night and 4.5 grams twice a night for a second night. Pre-dose breastmilk levels were 0.66 and 0.6 mg/L (6.3 and 5.8 micromoles/L) on the two nights, which represent normal endogenous milk levels. At 4 hours after the first 3 gram dose, the breastmilk level was 1.09 mg/L (10.44 micromoles/L); the milk level at 3 to 4 hours after the second dose was 1.7 mg/L (16.5 micromoles/L). Four hours after the first 4.5 gram dose, the breastmilk level was 2.5 mg/L (23.58 micromoles/L); the milk level at 3 to 4 hours after the second dose was 2.9 mg/L (27.5 micromoles/L). Breastmilk levels had returned to normal physiological levels by 6 to 7 hours after the second doses. The second mother collected milk samples after two pregnancies. Because of inconsistent results and a lack of baseline values with the first pregnancy, only results from the second pregnancy are reported here. At 9 months postpartum, she collected milk samples on 2 days while taking 2.25 and on one day while taking 3 grams twice nightly. A pre-dose sample contained 0.8 mcg/L (7.6 micromoles/L). Breastmilk oxybate concentrations were 1.5 and 3 mg/L (14.6 and 29.2 micromoles/L) at 4 hours after the second dose of 2.25 grams twice nightly. At 10 and 16 hours after her second dose, breastmilk levels were at baseline values of 1.6 and 1.2 mg/L (15.41 and 11.22 micromoles/L). Following twice nightly doses of 3 grams, her breastmilk levels at 4, 10 and 16 hours after the second dose were 3.5, 0.9 and 0.8 mg/L (34.01, 9.52 and 8.11 micromoles/L), respectively. The authors concluded that waiting 6 hours after the second dose before resuming breastfeeding would be preferred.[3] Some of the technical aspects of study have been questioned.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman was taking 4.5 grams of sodium oxybate twice daily (exact times not reported) for narcolepsy and cataplexy throughout pregnancy and lactation. She breastfed her infant (extent and times not stated). No adverse infant effects were reported.[2]

A woman with narcolepsy took sodium oxybate 4 grams each night at 10 pm and 2 am as well as fluoxetine 20 mg and cetirizine 5 mg daily throughout pregnancy and postpartum. She breastfed her infant except for 4 hours after the 10 pm oxybate dose and 4 hours after the 2 am dose. She either pumped breastmilk or breastfed her infant just before each dose of oxybate. The infant was exclusively breastfed, or breastmilk fed for 6 months when solids were introduced. The infant was evaluated at 2, 4 and 6 months with the Ages and Stages Questionnaires, which were withing the normal range as were the infant’s growth and pediatrician’s clinical impressions regarding the infant’s growth and development.[5]

An abstract reported a woman with narcolepsy who resumed taking sodium oxybate 6 grams at bedtime at 12 weeks postpartum. The mother reportedly used a structured pump-and-feed schedule. The infant demonstrated normal growth and development through three years of follow-up.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Narcolepsy) Amphetamine, Armodafinil, Dextroamphetamine, Lisdexamfetamine, Methylphenidate, Modafinil, Pitolisant

### References

1 Swick TJ. Postnatal treatment of women with narcolepsy who choose to breastfeed-time for a reappraisal? Sleep Med 2017;36:178-9.28684017
2 Busardo FP, Bertol E, Mannocchi G, . Determination of GHB levels in breast milk and correlation with blood concentrations. Forensic Sci Int 2016;265:172-81.26968013
3 Barker EC, Puchowicz M, Letterio J, . GHB levels in breast milk of women with narcolepsy with cataplexy treated with sodium oxybate. Sleep Med 2017;36:172-7.28668666
4 Busardo FP, Pichini S. GHB concentration in breast milk of narcoleptic women treated with sodium oxybate. How important it is to be careful when interpreting values. Sleep Med 2017;40:129.28821387
5 Gashlin LZ, Sullo D, Lawrence RA, . Treatment of narcolepsy with sodium oxybate while breastfeeding: A case report. Breastfeed Med 2016;11:261-3.27057786
6 Al-Tameemi Z, Aysola R. “Narcolepsy prepared me for motherhood”: Continuous sodium oxybate use in pregnancy and lactation with safe maternal and infant outcomes. Sleep 2026;49 (Suppl 1):A603. doi:10.1093/sleep/zsag091.1353

## Substance Identification

### Substance Name

Oxybate Salts

### CAS Registry Number

502-85-2 591-81-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics

Hypnotics and Sedatives

GABA Modulators